# Olmesartan

CASRN: 144689-24-7

## Drug Levels and Effects

### Summary of Use during Lactation

With the exception of one adverse reaction in a breastfed infant, no information is available on the use of olmesartan during breastfeeding. An alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A 6-day-old healthy full-term newborn was exposed to olmesartan in breastmilk. The maternal dose of olmesartan and extent of nursing were not reported. Weight gain was normal during the first two weeks of life, but at the pediatric checkup on the 17th day postpartum, an abrupt decrease in body weight was recorded. He was hospitalized on the 21st day, and mixed feeding with milk and formula was started. Biochemical examinations showed aspartate-aminotransferase (AST) 250 mg/dL, and regular urinalysis. Virologic and metabolic causes of elevated transaminase were ruled out. The baby started to regain weight and his AST gradually normalized to 50 mg/dL by the 24th day. Olmesartan intake was stopped and the child was discharged on the 24th day of life.[1]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Candesartan, Captopril, Benazepril, Enalapril, Lisinopril, Quinapril, Valsartan

### References

1 Salimova M, Maggi M, Crevani M, et al. Olmesartan-induced reversible transaminase elevation in a breastfed newborn. A case report. Neurotoxicol Teratol 2023;98:24. doi:10.1016/j.ntt.2023.107236

## Substance Identification

### Substance Name

Olmesartan

### CAS Registry Number

144689-24-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Angiotensin II Type 1 Receptor Blockers

Angiotensin Receptor Blockers

ARBs